# Benazepril

CASRN: 86541-75-5

## Drug Levels and Effects

### Summary of Use during Lactation

Because of the low levels of benazepril in breastmilk, amounts ingested by the infant are small and would not be expected to cause any adverse effects in breastfed infants.

### Drug Levels

Benazepril is an inactive drug that is metabolized to the active metabolite benazeprilat. Benazeprilat is poorly absorbed orally.

Maternal Levels. In 9 women (time postpartum not stated) given an oral dose of 20 mg of benazepril daily for 3 days, peak milk levels of 0.9 mcg/L of benazepril at 1 hour after the dose and 2 mcg/L of its active metabolite benazeprilat at 1.5 hours after the dose were detected. The authors estimated that the infant would receive a dose less than 0.14% of the mother's weight-adjusted dose of benazepril, mostly as benazeprilat.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Candesartan, Captopril, Enalapril, Lisinopril, Quinapril, Valsartan

### References

1 Kaiser G, Ackerman R, Dieterle W, et al. Benazepril and benazeprilat in human plasma and breast milk. Eur J Clin Pharmacol 1989;36 (Suppl):A303.doi:10.1007/BF02411402

## Substance Identification

### Substance Name

Benazepril

### CAS Registry Number

86541-75-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Angiotensin-Converting Enzyme Inhibitors

ACE Inhibitors